# Chloramphenicol

CASRN: 56-75-7

## Drug Levels and Effects

### Summary of Use during Lactation

Adverse reactions such as vomiting, excessive intestinal gas and falling asleep at the breast have been reported in breastfed infants whose mothers were taking oral chloramphenicol. Milk concentrations are not sufficient to induce "gray baby" syndrome, but since chloramphenicol-induced aplastic anemia is not dose-related, this might occur, but has not been reported. An alternate drug is preferred to chloramphenicol during breastfeeding, especially while nursing a newborn or preterm infant. If the mother must receive chloramphenicol during nursing, monitor the infant for gastrointestinal disturbances and adequacy of nursing. Monitoring of the infant's complete blood count and differential is advisable. In some cases, discontinuation of breastfeeding might be preferred.

### Drug Levels

Maternal Levels. Milk concentrations reported vary somewhat apparently due to the use of older assay techniques in early studies.[1-3]

Peak milk levels in 10 breastfeeding women were 1.7 to 2.8 mg/L during therapy with 250 mg orally 4 times daily and 3.6 to 6.1 mg/L during therapy with 500 mg orally 4 times daily.[1]

Four women were given a single dose of chloramphenicol 500 mg orally. The average peak milk concentration of 3.24 mg/L (range 2.5 to 4.5 mg/L) occurred 2 hours after the dose. By 8 hours after the dose, the milk concentration averaged 0.31 mg/L. In 5 other women given chloramphenicol 500 mg 3 times daily by mouth at 7-hour intervals for 2 days, breastmilk chloramphenicol levels were 1.72 and 0.66 mg/L at 24 and 48 hours after the first dose. The average half-life in milk was 1.77 hours.[2]

After a single oral dose of 500 mg of chloramphenicol in 2 women, the drug was first measurable in milk in a concentration of 3.3 mg/L 2 hours after the dose. At 4 and 6 hours after the dose, milk concentrations averaged 4.1 mg/L at both times.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One study reported 50 breastfed infants whose mothers were give oral chloramphenicol beginning 2 to 12 days postpartum in dosages of 1 (n = 20), 2 (n = 20)or 3 grams (n = 10) daily. All of the infants refused to suck, and 50 to 60% fell asleep during nursing. Vomiting occurred after feeding in 10%, 25%, and 90% of infants with daily maternal dosages of 1, 2 and 3 grams, respectively. All infants had excessive intestinal gas and abdominal distention, with severe problems in 0.5%, 20% and 100% of infants with daily maternal dosages of 1, 2 and 3 grams, respectively.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Havelka J, Hejzlar M, Popov V, et al. (1968). Excretion of chloramphenicol in human milk. Chemotherapia (Basel).
2 Plomp TA, Thiery M, Maes RA. (1983). The passage of thiamphenicol and chloramphenicol into human milk after single and repeated oral administration. Vet Hum Toxicol.
3 Matsuda S. (1984). Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol.
4 Havelka J, Frankova A. (1972). Cesk Pediatr.

## Substance Identification

### Substance Name

Chloramphenicol

### CAS Registry Number

56-75-7

### Drug Class

Breast Feeding

Lactation

Anti-Infective Agents

Antibacterial Agents